# Amisulpride

CASRN: 53583-79-2

## Drug Levels and Effects

### Summary of Use during Lactation

Excretion of amisulpride into breastmilk is higher than with other pharmacologically similar drugs. Most information on amisulpride is with continuous oral use as a psychotherapeutic agent. For these uses, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.[1-3] After a single dose for post-operative nausea and vomiting, the manufacturer suggests waiting 48 hours before resuming breastfeeding; however, with a half-life of 4 to 5 hours, a waiting period of 12 to 24 hours should be adequate to avoid large amounts being excreted into breastmilk.

### Drug Levels

Maternal Levels. A nursing mother was taking oral amisulpride 100 mg twice daily at 8:00 am and 12:30 pm, and desvenlafaxine 250 mg daily. Eight breastmilk samples were obtained over a 24-hour period with a breast pump. The average breastmilk concentration was 1.2 mg/L which equated to an infant dose of 183 mcg/kg daily or 6.1% of the maternal weight-adjusted dosage.[4]

A woman who was 13 months postpartum had been taking amisulpride 400 mg (5 mg/kg) once daily for 9 days. Eight milk samples were obtained over a 24-hour period and consisted of about 50% foremilk and 50% hindmilk. The average breastmilk concentration was 1.6 mg/L which would provide a fully breastfed infant a dose of 534 mcg/kg daily or 10.7% of the maternal weight-adjusted dosage.[5]

A woman began taking amisulpride 100 mg every 12 hours beginning at 34 weeks postpartum and continuing postpartum for psychosis and anxiety. At 4 days postpartum, milk samples were collected before the morning dose and at 4 more times during the 12 hours after the dose. The average concentration of amisulpride in breastmilk was 894 mcg/L. The exclusively breastfed infant would ingest a dose of 0.134 mg/kg daily, corresponding to 4.7% of the maternal weight-adjusted dosage. Because the milk to plasma ratio at the peak time was about 12 times the simultaneous maternal serum concentration and much higher than the predicted ratio of 2.5, the authors suggested that amisulpride is actively secreted into breastmilk.[6]

Infant Levels. A nursing mother had been taking oral amisulpride 100 mg twice daily at 8:00 am and 12:30 pm, and desvenlafaxine 250 mg daily for 12.6 weeks. Her partially breastfed infant was 5 months old. The infant's serum amisulpride concentration 3.1 hours after the mother's daily dose was 4 mcg/L or 3.9% of the maternal serum concentration.[4]

A woman began taking amisulpride 100 mg every 12 hours beginning at 34 weeks postpartum and continuing postpartum for psychosis and anxiety. Her infant was exclusively breastfed. At 4 days postpartum, a blood sample was obtained from the infant at 3.25 hours after the mother's morning dose. The time of the last breastfeeding was not stated. The infant had a serum amisulpride concentration of 10 mcg/L, which was 10.5% of the maternal serum concentration obtained 5 minutes earlier.[6] Some residual effect of transplacental passage cannot be ruled out at 4 days postpartum with the available data.

### Effects in Breastfed Infants

A 13-month-old infant was partially breastfed by a mother who was taking amisulpride 400 mg, fluvoxamine 200 mg, and azathioprine 150 mg daily, and was using nicotine chewing gum for smoking cessation. The mother had been taking amisulpride for 9 days; the duration of the other medications was not stated. A pediatric examination found the infant to be developing well.[5]

A woman with long-standing schizophrenia was treated with amisulpride 400 mg and haloperidol 5 mg daily throughout most of her pregnancy and during breastfeeding (extent not stated). Follow-up of the breastfed infant for 13 months by a pediatrician found no adverse effects and normal development of the infant.[7]

### Effects on Lactation and Breastmilk

Amisulpride increases serum prolactin and may cause galactorrhea at a higher rate than other psychotropic drugs.[8-16] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(Antipsychotics) Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Uguz F. Second-generation antipsychotics during the lactation period: A comparative systematic review on infant safety. J Clin Psychopharmacol 2016;36:244-52.27028982
2 Pacchiarotti I, Leon-Caballero J, Murru A, et al. Mood stabilizers and antipsychotics during breastfeeding: Focus on bipolar disorder. Eur Neuropsychopharmacol 2016;26:1562-78.27568278
3 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e126.30601177
4 Ilett KF, Watt F, Hackett LP, et al. Assessment of infant dose through milk in a lactating woman taking amisulpride and desvenlafaxine for treatment-resistant depression. Ther Drug Monit 2010;32:704-7.20926994
5 Teoh S, Ilett KF, Hackett LP, et al. Estimation of rac-amisulpride transfer into milk and of infant dose via milk during its use in a lactating woman with bipolar disorder and schizophrenia. Breastfeed Med 2011;6:85-8.20925494
6 O'Halloran SJ, Wong A, Joyce DA. A liquid chromatography-tandem mass spectrometry method for quantifying amisulpride in human plasma and breast milk, applied to measuring drug transfer to a fully breast-fed neonate. Ther Drug Monit 2016;38:493-8.27027463
7 Uguz F. Breastfed infants exposed to combined antipsychotics: Two case reports. Am J Ther 2016;23:e1962-e1964.26539905
8 Kopecek M, Bares M, Svarc J, et al. Hyperprolactinemia after low dose of amisulpride. Neuro Endocrinol Lett 2004;25:419-22.15665803
9 Paparrigopoulos T, Liappas J, Tzavellas E, et al. Amisulpride-induced hyperprolactinemia is reversible following discontinuation. Prog Neuropsychopharmacol Biol Psychiatry 2007;31:92-6.16938372
10 Bushe C, Shaw M. Prevalence of hyperprolactinaemia in a naturalistic cohort of schizophrenia and bipolar outpatients during treatment with typical and atypical antipsychotics. J Psychopharmacol 2007;21:768-73.17606473
11 Mendhekar D, Lohia D. Amisulpride and galactorrhoea: Delayed or withdrawal? World J Biol Psychiatry 2009;10 (4 Pt 3):1041-2.19006011
12 Ružić K, Grahovac T, Graovac M, et al. Hyperprolactinaemia with amisulpride. Psychiatr Danub 2011;23:92-4.21448106
13 Kropp S, Ziegenbein M, Grohmann R, et al. Galactorrhea due to psychotropic drugs. Pharmacopsychiatry 2004;37 (Suppl 1):S84-8.15052519
14 Glocker C, Grohmann R, Engel R, et al. Galactorrhea during antipsychotic treatment: Results from AMSP, a drug surveillance program, between 1993 and 2015. Eur Arch Psychiatry Clin Neurosci 2021;271:1425-35.33768297
15 Lee BH, Kim YK, Park SH. Using aripiprazole to resolve antipsychotic-induced symptomatic hyperprolactinemia: A pilot study. Prog Neuropsychopharmacol Biol Psychiatry 2006;30:714-7.16571367
16 Düring SW, Nielsen MØ, Bak N, et al. Sexual dysfunction and hyperprolactinemia in schizophrenia before and after six weeks of D(2/3) receptor blockade - An exploratory study. Psychiatry Res 2019;274:58-65.30780063

## Substance Identification

### Substance Name

Amisulpride

### CAS Registry Number

53583-79-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Dopamine Antagonists